# Rabeprazole

CASRN: 117976-89-3

## Drug Levels and Effects

### Summary of Use during Lactation

Because no information is available on the use of rabeprazole during breastfeeding, an alternate drug may be preferred, especially while nursing a newborn or preterm infant.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

A retrospective claims database study in the United States found that users of proton pump inhibitors had an increased risk of gynecomastia.[1]

The Spanish pharmacovigilance system found one case of a 90-year-old man who developed gynecomastia associated with rabeprazole reported during the time period of 1982 to 2006. The reaction occurred after 32 days of therapy and resolved after discontinuation of the drug.[2]

A review article reported that a search of database from the European Pharmacovigilance Centre found 11 cases of gynecomastia, 3 cases of galactorrhea, 2 cases of breast pain and 1 case of breast enlargement associated with rabeprazole. A search of the WHO global pharmacovigilance database found 38 cases of gynecomastia, 29 cases of galactorrhea, 28 cases of breast pain and 5 cases of breast enlargement associated with rabeprazole.[3]

A woman was prescribed metronidazole 400 mg three times a day, and a combination product containing rabeprazole 20 mg and domperidone 30 mg daily for diarrhea and dyspepsia. After 3 days of treatment, she developed bilateral galactorrhea. The combination of rabeprazole and domperidone was thought to be the cause.[4]

A 27-year-old woman with gastroesophageal reflux disease was prescribed rabeprazole 20 mg once daily. After 10 days of treatment, she complained of sudden-onset bilateral galactorrhea. A bilateral breast ultrasound demonstrated dilated retroareolar ducts containing anechoic fluid. Her serum prolactin level was 245 ng/mL (normal range 4.79 to 23.3 ng/mL). Ten days after discontinuing rabeprazole, her serum prolactin had returned to a normal value of 15.0 ng/mL and her symptoms resolved.[5]

### Alternate Drugs to Consider

Antacids, Cimetidine, Famotidine, Omeprazole, Pantoprazole, Sucralfate

### References

1 He B, Carleton B, Etminan M. Risk of gynecomastia with users of proton pump inhibitors. Pharmacotherapy 2019;39:614–8.30865318
2 Carvajal A, Macias D, Gutierrez A, . Gynaecomastia associated with proton pump inhibitors: A case series from the Spanish Pharmacovigilance System. Drug Saf 2007;30:527–31.17536878
3 Ashfaq M, Haroon MZ, Alkahraman YM. Proton pump inhibitors therapy and risk of hyperprolactinemia with associated sexual disorders. Endocr Regul 2022;56:134–47.35489049
4 Patrascu OM, Chopra D, Dwivedi S. Galactorrhoea: Report of two cases. Maedica (Bucur) 2015;10:136–9.28275406
5 Sheikh FA, Khakhar Z, Bhogal G, . Risk of proton pump inhibitor (PPI)-induced galactorrhea: An uncommon adverse effect of a common drug. Cureus 2025;17:e81050.40271284

## Substance Identification

### Substance Name

Rabeprazole

### CAS Registry Number

117976-89-3

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Ulcer Agents

Gastrointestinal Agents

Proton Pump Inhibitors